# Lithium

CASRN: 554-13-2

## Drug Levels and Effects

### Summary of Use during Lactation

Lithium excretion into breastmilk and concentrations in infant serum are highly variable. Although lithium appears on some lists of drugs contraindicated during breastfeeding,[1] most sources do not consider it an absolute contraindication in healthy-full-term infants, especially in infants over 2 months of age and during lithium monotherapy.[2-9] Numerous reports exist of infants who were breastfed during maternal lithium therapy without any signs of toxicity or developmental problems. Most were breastfed from birth and some infants continued to nurse for up to 1 year of maternal lithium therapy. Reports suggest that lithium in milk can adversely affect the infant acutely when its elimination is impaired, as in dehydration or in newborn or premature infants. Neonates may also have transplacentally acquired serum lithium levels. Lithium levels in these infants decline whether they are breastfed or not, although serum levels may fall more slowly in exclusively breastfed infants.[10,11] The long-term effects of lithium on infants are not certain, but limited data indicate no obvious problems in growth and development.[9,10,12]

Lithium may be used in mothers of full-term infants who are willing and able to monitor their infants.[13] Because maternal lithium requirements and dosage may be increased during pregnancy, maternal serum levels should be monitored frequently postpartum and dosage reduced as necessary to avoid excessive infant exposure via breastmilk.[14] Infants with higher lithium levels at birth have more side effects and are more likely to be admitted to the NICU.[15] Discontinuing lithium 24 to 48 hours before Cesarean section delivery or at the onset of spontaneous labor and resuming the prepregnancy lithium dose immediately after delivery should minimize the infant's serum lithium concentration at birth.[16] Some investigators recommend monitoring infant serum lithium, serum creatinine, BUN, and TSH in intervals ranging from "periodic" to every 4 to 12 weeks during breastfeeding and maternal lithium therapy.[4,13,17] One group recommends monitoring maternal and infant serum lithium at 2 and 10 days postpartum in mixed-fed infants with additional monitoring at 30 and 60 days postpartum for exclusively breastfed infants.[10] A systematic review recommends infant lithium serum level, thyroid and renal function tests only at 10 days postpartum, then only if the infant’s serum lithium is 0.3 mEq/L or greater or if clinical signs of toxicity appear.[18] However, others recommend close pediatric follow-up of the infant and only selective laboratory monitoring (i.e., serum lithium, creatinine, TSH, BUN) if clinically indicated by unusual behavior, restlessness, feeding difficulties, sedation or abnormal growth and development. Infants who are preterm, dehydrated, or have an infection, should receive hydration and be assessed for lithium toxicity.[6,7] If the infant serum lithium level is elevated, reducing the percentage of breastfeeding can decrease it.[9]

### Drug Levels

Maternal Levels. Most older reports of lithium levels in breastmilk did not characterize breastmilk lithium excretion in a rigorous manner. Random milk levels have been reported to range from 0.12 to 0.7 mEq/L and appear to be rather consistent at about 40 to 45% of the simultaneous maternal serum level.[19-22] The milk concentration of lithium in one woman was found to be inversely proportional to milk volume. The milk to plasma ratio was found to be directly proportional to serum lithium; the ratio was about 1 with low serum lithium and 1.5 with higher serum lithium levels, indicating disproportionately higher lithium excretion into milk with higher serum levels.[23]

From data published up to 1990 concerning 6 infants, it is estimated that a fully breastfed infant would receive about 26% (range 11 to 42%) of the maternal weight-adjusted dosage of lithium.[20-25] However, many of these case reports were of poor quality.

A more recent case series of 11 mothers that used better techniques found the relative infant dosage to be 12.2% (range 0 to 30%) of the maternal weight-adjusted dosage.[26] The reason for the difference between the older and more recent data is not apparent.

A case series reported 10 mothers taking lithium carbonate in an average daily dosage of 850 mg (range 600 to 1200 mg daily) for bipolar disorder. Lithium milk levels in 26 milk samples taken between 8.1 and 27.5 weeks postpartum averaged 0.35 mEq/L (range 0.19 to 0.48 mEq/L). No difference was found between concentrations in fore- and hindmilk samples.[17]

One woman who was taking 1200 mg of lithium carbonate daily (dosage schedule and product not reported) had a milk lithium concentration of 0.41 mmol/L at 20 hours after her previous dose. This was about the same as her simultaneous blood concentration.[27]

Infant Levels. The serum lithium levels in the breastfed infants of mothers taking lithium have ranged from 10 to 50% of simultaneous maternal serum lithium levels.[20,24,26,28] One infant, who previously had a serum level about 50% of the mother's, became dehydrated and developed a serum level that was double that of the mother's.[28]

A 5-day-old infant developed cyanosis, lethargy, ECG T-wave inversion probably caused by lithium in breastmilk. The infant’s serum lithium concentration was 0.6 mEq/L at 5 days of age and 0.21 mEq/L on day 7, 2 days after breastfeeding was discontinued.[24]

Ten exclusively breastfed infants whose mothers were taking an average of 850 mg daily of lithium carbonate had serum levels of 0.16 mEq/L or 24% (range 11 to 56%) of maternal serum levels.[17]

Two breastfed infants (extent not stated) were reported whose mothers were taking lithium carbonate during pregnancy and postpartum. The first mother was taking 1200 mg daily and the infant's serum concentrations were 0.11 mmol/L on day on day 4 and undetectable (<0.1 mmol/L) on days 6 and 10 postpartum. The second mother was taking 900 mg daily and her breastfed infant's serum lithium concentration was undetectable (<0.3 mmol/L) on day 3 of life. Both infants had other serum concentration measurements that were in the therapeutic or toxic ranges but displayed no symptoms. These samples apparently had been collected in tubes containing lithium heparin.[27]

A woman took lithium carbonate orally 800 mg daily during pregnancy and postpartum while exclusively breastfeeding her infant. The mother had a serum lithium concentration of 0.74 mmol/L at 15 days postpartum. The infant's serum lithium concentration was 0.26 mmol/L at this time. Further serum lithium concentrations in the infant were 0.23 mmol/L at 1 and 2 months of age and 0.17 mmol/L at 6 months of age.[29]

Three mothers took lithium carbonate during pregnancy and breastfeeding. One mother took a dosage of 900 mg daily during 2 pregnancies. Her infants' serum lithium concentrations were 0.08 mEq/L at 31 days and 183 days postpartum in the first pregnancy and 0.11 mEq/L at 43 days of age in the second pregnancy. These values were 11%, 17% and 15% of the mother's simultaneous serum lithium concentrations, respectively. The second mother also took a dosage of 900 mg daily. Her infant's serum lithium concentration was 0.08 mEq/L at 39 days postpartum, or 10% of the mother's simultaneous serum lithium concentration. The third mother took a dosage of 1350 mg daily. Her infant's serum lithium concentration was 0.11 mEq/L at 31 days postpartum, or 11% of the mother's simultaneous serum lithium concentration.[16]

A woman with bipolar disorder was taking lithium 600 to 900 mg daily during pregnancy and postpartum. At 10 days postpartum, her infant's serum lithium level was 0.26 mmol/L, which was 58% of the maternal trough serum level. Lithium was discontinued. First quetiapine, then aripiprazole were substituted for lithium, but after 2 to 3 weeks she switched back to lithium at an unspecified dosage. After several weeks of treatment, her infant's lithium level was 0.2 mmol/L.[30]

A woman with bipolar disorder took prolonged-release lithium carbonate 400 mg (Plenur-Faes Pharma, Spain) every 12 hours during pregnancy and postpartum. She breastfed her infant exclusively for 33 days but introduced supplements for 16 days because of slow weight gain. After 16 days, she exclusively breastfed her infant until 2.5 months of age, when mixed feeding began. The infant's serum lithium levels were monitored at 17 days, 1 month, 3.5 months and 5.5 months of age. Lithium levels were less than 0.2 mmol/L at all these time points.[31]

A case series from Germany reported 3 breastfed infants whose mothers were taking lithium. The first infant’s mother was taking 1000 mg daily of lithium carbonate (Hypnorex ret., Essential Pharma Ltd.). The infant’s serum lithium levels were 0.09 and 0.12 mEq/L at 1 and 2 months postpartum, respectively. These levels corresponded to 12.5% and 13.5% of the mother’s serum lithium levels on those days. The second woman was taking 450 mg daily of lithium (Quilonum® retard, Teofarma S.R.L. or GlaxoSmith Kline) and partially (about 50%) breastfed her infant for the first 4 months postpartum. At 2 months of age, the infant’s serum lithium level was <0.1 mEq/L. The third mother was taking lithium 225 mg daily (also Quilonum® retard) postpartum and exclusively breastfed her infant. At 11 days postpartum, the infant’s serum lithium concentration was 0.11 mEq/L, which was 42.3% of the mother’s serum lithium concentration.[32]

Nine exclusively breastfed infants whose mothers were taking lithium carbonate twice daily had blood samples taken once on days 1 to 5, 7 to 11, at one month and monthly thereafter. A cord blood sample was also taken. Mothers were taking a mean dosage of 956 mg (range 600 and 1600 mg) daily. The cord blood lithium level ranged from 1.05 to 1.3 times the maternal blood level. Excluding the cord blood samples, the overall average infant blood to maternal blood ratio was 0.58 (range 0.12 to 1.09) The infant to maternal blood ratio decreased in all infants postpartum, by an average of 44% at 1 month and 59% at 3 months of age.[33]

Twenty-four women taking lithium during pregnancy for bipolar disorder were divided into 3 groups: exclusive breastfeeding, partial (50 to 80%) breastfeeding and exclusive formula feeding postpartum. Lithium was discontinued at the onset of labor for a spontaneous delivery or 12 hours before a scheduled caesarean section or induction. Breastfeed was reinitiated at the same dose 6 hours after vaginal delivery or 12 hours after caesarean section. Infant serum lithium concentrations were obtained at approximately 2, 7, 15, 30 and 60 days. The median times for infant serum concentrations to fall to 0.2 mEq/L were 6 to 8 days for formula-fed infants, 7 to 8 days for mixed-fed infants, and 53 to 60 days for exclusively breastfed infants. No accumulation of lithium was observed in exclusively breastfed infants.[10]

A 15-year retrospective study from two hospitals in Sweden observed 30 infants who had been breastfed by mothers taking lithium. Infants were mostly breastfed greater than 50% with 3 exclusively breastfed. A total of 66 infant serum levels were recorded. The mean lithium serum concentration was 0.19 mmol/L in the first two weeks of life, 0.16 mmol/L in week 2 to 4 (range <0.05-1.2 mmol/L), 0.07 mmol/L in the second month of life (range <0.05-0.2 mmol/L) and 0.08 mmol/L after 2 months of age (range <0.05-0.2 mmol/L). Concentrations measured before one month of age were significantly higher than those measured after one month of age. The mean infant to mother serum lithium concentration ratio was highest at 1 to 2 weeks of age at 0.37, about 0.18 from 2 to 4 weeks of age, and about 0.1 thereafter. Two infants had elevated serum lithium concentrations. One infant, born at 35+2 weeks of gestation, had a serum lithium concentration of 0.7 mmol/L at 12 days of age and had been about 75% breastfed. The level was 17% higher than the maternal concentration. The mother was recommended to reduce breastfeeding to around 50%, and 4 days later the infant’s lithium concentration was undetectable (<0.05 mmol/L). Another infant had a serum lithium concentration of 1.2 mmol/L at the first follow-up visit at 29 days of age. Breastfeeding was discontinued and no clinical complications were noted.[9]

In a retrospective chart review, 25 breastfed infants who were exposed to lithium in utero and were born with detectable serum lithium levels at birth were followed postpartum. At hospital discharge, 46% were exclusively breastfed and at 2 to 4 weeks of age, 58% were exclusively breastfed. Infants with high serum concentrations (average 0.9 mEq/L; n = 7) at birth had higher median serum concentrations at follow-up of 0.20 mEq/L (range 0.10 to 1.20 mEq/L) than those in the low serum level group of 0.06 mEq/L (range <0.05 to 0.3 mEq/L).[15]

A retrospective chart review found 4 infants whose mothers took lithium while breastfeeding. Two mothers taking 900 mg daily of immediate-release lithium exclusively breastfed their infants. One infant had lithium blood levels of 0.5 and 0.1 mmol/L on postnatal days 5 and 12, respectively. The other had a blood level of 0.1 mmol/L on postnatal 146. The two other infants were partially breastfed (extent not stated) by mothers taking 600 mg of sustained-release lithium daily. Lithium blood levels were 0.1 mmol/L on day 6 in one infant and days 22 and 63 in the other.[34]

A report of 19 infants over 8 years exposed to lithium during pregnancy found the following infant serum concentrations: 0.58 mmol/L on day 1 of life, 0.3 mmol/L between day 2 to 7 postpartum, and <0.1 mmol/L on a day after day 8 postpartum. Eleven of the 19 infants were receiving some breastmilk.[11]

### Effects in Breastfed Infants

In older reports, at least 24 infants have been reported to have been breastfed during maternal lithium therapy without any signs of toxicity or developmental problems. All were breastfed from birth and some continued to nurse for up to 6 months of maternal lithium therapy.[17,20-22,26,27,29]

A 5-day-old infant developed cyanosis, lethargy, ECG T-wave inversion probably caused by lithium in breastmilk.[24] The mother had been receiving the long-acting diuretic chlorthalidone prior to delivery which probably decreased the infant's lithium elimination and increased the neonate's lithium serum levels. Another case of probable infant lithium intoxication appeared only after the infant had a cold which may have led to dehydration and decreased lithium excretion.[28,35] Two other infants had slight increases in thyrotropin (TSH) levels at 8 and 4 weeks of age, respectively, after lithium exposure that began during pregnancy. Elevated TSH continued until maternal lithium was stopped in one,[17] and normalized by 2 months postpartum in the other, despite continued exclusive breastfeeding.[29]

Three mothers took lithium carbonate during pregnancy and breastfeeding. The first infant was born to a mother who also took bupropion 300 mg and levothyroxine 50 to 75 mcg daily. She breastfed beyond 1 year of age. Her infant did not regain birth weight by 15 days of age, was somewhat hypotonic at 2 months of age, and was treated for gross and fine motor delay for the first year of life. The mother had a second infant on the same drug regimen. She exclusively breastfed her infant who developed normally without hypotonia. A second mother was taking a lithium dosage of 900 mg daily. Her infant gained weight slowly, but weight gain increased with breastfeeding support, and she exclusively breastfed her infant for 4 months. A third mother was taking 1350 mg of lithium daily as well as escitalopram 10 mg, levothyroxine 25 mcg and heparin (dosage not stated) daily during pregnancy and breastfeeding. Her infant was normal and was exclusively breastfed until 8 weeks of age when the maternal serum lithium concentration was excessive at 2.0 mEq/L. Breastfeeding was withheld for 2 days and the dosage lowered to 600 mg daily. She then breastfed successfully until 7 months of age.[16]

A woman with bipolar disorder took prolonged-release lithium carbonate 400 mg every 12 hours during pregnancy and postpartum. She breastfed her infant exclusively for 33 days but introduced supplements for 16 days because of slow weight gain. After 16 days, she exclusively breastfed her infant until 2.5 months of age, when mixed feeding began. The infant was monitored at 17 days, 1 month, 3.5 months and 5.5 months of age. No infant side effects were observed at any time. Lithium levels were not detectable, and serum creatinine and thyroid-stimulating hormone levels were normal.[31]

Three infants were breastfed (2 exclusive, one 50%) during maternal lithium therapy. The infants were breastfed for 5 to 21 months. All had normal growth and development, as well as normal renal and thyroid levels.[32]

Nine infants whose mothers were taking lithium in an average dosage of 956 mg daily were exclusively breastfed for an average of 93 days (range 15 to 189 days). After routine follow-up examinations by a pediatrician, no acute growth or developmental delays were reported in any infant during the follow-up period.[33]

Twenty-four women taking lithium during pregnancy and postpartum for bipolar disorder were divided into 3 groups: exclusive breastfeeding, partial (50 to 80%) breastfeeding, and exclusive formula feeding. Infants were followed for up to 60 days of age. During the follow-up period, pediatricians found no observable growth or developmental delay in infants in any of the three groups.[10]

A 15-year retrospective study from two hospitals in Sweden observed 30 infants who had been breastfed by mothers taking lithium. None of the infants experienced an adverse event from lithium. All the serum sodium, potassium, creatinine, thyroid stimulating hormone and thyroid hormone (values measured were within the normal range, except for one sodium and one potassium level that were 0.1 mmol/L outside of the normal range, without any clinical consequence. No infants were described as irritable, and all had normal muscle tone. About 25% of the infants had inadequate growth during their first month of life. Four mothers were advised to reduce breastfeeding and to increase the amount of formula given because of poor infant growth (n = 1), polypharmacy (n = 1) or elevated serum lithium concentrations in the infants (n = 2). Two infants were described as tired at their first outpatient visits, but their serum lithium concentration was only 0.2 mmol/L. One of them also had poor weight gain and hyperbilirubinemia at nine days of age, but one week later the baby was healthy and growing well.[9]

In a retrospective chart review, 25 breastfed infants who were exposed to lithium in utero and were born with detectable serum lithium levels at birth were followed postpartum. At hospital discharge, 46% were exclusively breastfed and at 2 to 4 weeks of age, 58% were exclusively breastfed. Infants with high serum concentrations (average 0.9 mEq/L; n = 7) at birth had more complications than those with low serum concentrations (average 0.4 mEq/L; n = 18). At follow-up, the rate of neonatal symptoms was 28.6% in the infants with high serum levels at birth and 11.8% in those with low levels.[15]

A retrospective chart review at one institution identified seven infants who were exposed to lithium in breastmilk. Four of the infant charts were available and reviewed throughout the first year of life, during which time two infants were exclusively breastfed, and two were partially breastfed. There were no adverse events noted in the infant medical records related to lithium exposure including no diagnosed development delays, no cases of lithium toxicity, and no renal or thyroid abnormalities.[34]

### Effects on Lactation and Breastmilk

Lithium increases serum prolactin.[36-38] Galactorrhea was reported in a woman taking lithium carbonate for 50 days. Lactation ceased with lithium discontinuation.[38] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Bipolar Disorder) Divalproex, Olanzapine, Quetiapine, Risperidone, Valproic Acid

### References

1 Poels EMP, Bijma HH, Galbally M, et al. Lithium during pregnancy and after delivery: A review. Int J Bipolar Disord 2018;6:26.30506447
2 Pacchiarotti I, Leon-Caballero J, Murru A, et al. Mood stabilizers and antipsychotics during breastfeeding: Focus on bipolar disorder. Eur Neuropsychopharmacol 2016;26:1562–78.27568278
3 Uguz F, Sharma V. Mood stabilizers during breastfeeding: A systematic review of the recent literature. Bipolar Disord 2016;18:325–33.27297617
4 Khan SJ, Fersh ME, Ernst C, et al. Bipolar disorder in pregnancy and postpartum: Principles of management. Curr Psychiatry Rep 2016;18:13.26781551
5 Galbally M, Bergink V, Vigod SN, et al. Breastfeeding and lithium: Is breast always best? Lancet Psychiatry 2018;5:534–6.29731410
6 Newmark RL, Bogen DL, Wisner KL, et al. Risk-benefit assessment of infant exposure to lithium through breast milk: A systematic review of the literature. Int Rev Psychiatry 2019;31:295–304.31180257
7 Hermann A, Gorun A, Benudis A. Lithium use and non-use for pregnant and postpartum women with bipolar disorder. Curr Psychiatry Rep 2019;21:114.31701245
8 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
9 Heinonen E, Tötterman K, Bäck K, et al. Lithium use during breastfeeding was safe in healthy full-term infants under strict monitoring. Acta Paediatr 2022;111:1891–8.35673836
10 Imaz ML, Langohr K, Torra M, et al. Neonatal feeding trajectories in mothers with bipolar disorder taking lithium: Pharmacokinetic data. Front Pharmacol 2021;12:752022.34630122
11 Stafford K, Doogue M, Harris S. Safety of lithium use during breastfeeding: A study of infant plasma lithium levels. J Paediatr Child Health 2024;60:167–8. doi:10.1111/jpc.16527
12 Grandjean EM, Aubry JM. Lithium: Updated human knowledge using an evidence-based approach: Part III: Clinical safety. CNS Drugs 2009;23:397–418.19453201
13 Betcher HK, Vydysh A, Ellington BD, et al. Management of lithium in pregnancy and lactation: An individualized approach. Curr Psychiatry Rep 2026;28 42060030
14 Westin AA, Brekke M, Molden E, et al. Changes in drug disposition of lithium during pregnancy: A retrospective observational study of patient data from two routine therapeutic drug monitoring services in Norway. BMJ Open 2017;7:e015738.28249852
15 Whaites Heinonen E, Tötterman K, Bäck K, et al. High lithium concentration at delivery is a potential risk factor for adverse outcomes in breastfed infants: A retrospective cohort study. Int J Bipolar Disord 2023;11:36.38032417
16 Bogen DL, Sit D, Genovese A, et al. Three cases of lithium exposure and exclusive breastfeeding. Arch Womens Ment Health 2012;15:69–72.22277970
17 Viguera AC, Newport DJ, Ritchie J, et al. Lithium in breast milk and nursing infants: Clinical implications. Am J Psychiatry 2007;164:342–5.17267800
18 Imaz ML, Torra M, Soy D, et al. Clinical lactation studies of lithium: A systematic review. Front Pharmacol 2019;10:1005.31551795
19 Schou M, Amdisen A. Lithium and pregnancy--III, lithium ingestion by children breast-fed by women on lithium treatment. Br Med J 1973;2:138.4699592
20 Sykes PA, Quarrie J, Alexander FW. Lithium carbonate and breast-feeding. Br Med J 1976;2:1299.1000200
21 Weinstein MR, Goldfield M. Lithium carbonate treatment during pregnancy. Dis Nerv Syst 1969;30:828–32.5369134
22 Wise MG, Javors MA, Funderburg LG, et al. Lithium levels in bodily fluids of a nursing mother and infant. Lithium 1990;1:189–91.
23 Shimizu M, Matsuda H, Sakaue N, et al. A few findings on lithium levels in mother milk -- from one case which fell into a manic state after childbirth. Seishin Shinkeigaku Zasshi 1981;83:399–405.7330110
24 Tunnessen WW, Jr, Hertz CG. Toxic effects of lithium in newborn infants: A commentary. J Pediatr 1972;81:804–7.5074360
25 Fries H. Lithium in pregnancy. Lancet 1970;295:1233.4192416
26 Moretti ME, Koren G, Verjee Z, et al. Monitoring lithium in breast milk: An individualized approach for breast-feeding mothers. Ther Drug Monit 2003;25:364–6.12766565
27 Tanaka T, Moretti ME, Verjee ZH, et al. A pitfall of measuring lithium levels in neonates. Ther Drug Monit 2008;30:752–4.19057375
28 Skausig OB, Schou M. Breast feeding during lithium therapy. Ugeskr Laeger 1977;139:400–1.841726
29 Marín Gabriel MA, Olza Fernández, I, Donoso E, et al. Lithium and artificial breastmilk; or is maternal breastfeeding better? An Pediatr (Barc) 2011;75:67–8.21420368
30 Frew JR. Psychopharmacology of bipolar I disorder during lactation: A case report of the use of lithium and aripiprazole in a nursing mother. Arch Womens Ment Health 2015;18:135–6.25352315
31 Marín Gabriel, MA, Malalana Martínez, AM, Olza Fernández, I. Lithium while breastfeeding: Case report. Arch Argent Pediatr 2018;116:e319–e21.29557625
32 Gehrmann A, Fiedler K, Leutritz AL, et al. Lithium medication in pregnancy and breastfeeding-a case series. Medicina (Kaunas) 2021;57:634.34207460
33 Imaz ML, Soy D, Torra M, et al. Case report: Clinical and pharmacokinetic profile of lithium monotherapy in exclusive breastfeeding. A follow-up case series. Front Pharmacol 2021;12:647414.34248617
34 Kummerlowe MN, Leung JG, Kummer LA, et al. Retrospective review of postpartum lithium use including during lactation. Breastfeed Med 2024;19:796–800.39109411
35 Schou M. Lithium treatment during pregnancy, delivery, and lactation: An update. J Clin Psychiatry 1990;51:410–3.2211538
36 Baştürk M, Karaaslan F, Esel E, et al. Effects of short and long-term lithium treatment on serum prolactin levels in patients with bipolar affective disorder. Prog Neuropsychopharmacol Biol Psychiatry 2001;25:315–22.11294478
37 Cowen PJ, Cohen PR, McCance SL, et al. 5-HT neuroendocrine responses during psychotropic drug treatment: An investigation of the effects of lithium. J Neurosci Methods 1990;34:201–5.2259242
38 Ohishi K, Higashimura T. A case of manic state in which lactation occurred after Li2CO3 administration. Folia Psychiatr Neurol Jpn 1983;37:33–6.6411540

## Substance Identification

### Substance Name

Lithium

### CAS Registry Number

554-13-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Lithium